# Acoltremon

CASRN: 68489-09-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of acoltremon during breastfeeding. Acoltremon is poorly absorbed by the mother and amounts reaching the breastmilk are likely very low. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 2 to 5 minutes, then remove the excess solution with an absorbent tissue. If a mother requires acoltremon, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Acoltremon

### CAS Registry Number

68489-09-8

### Drug Class

Breast Feeding

Lactation

Milk, Human